# Fluorouracil

CASRN: 51-21-8

## Drug Levels and Effects

### Summary of Use during Lactation

Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy.[1] It might be possible to breastfeed safely during intermittent therapy with an appropriate period of breastfeeding abstinence. The duration of abstinence is not clear, but some have suggested a period of 24 hours before resuming nursing, while others have used a 72-hour abstinence period safely.[2,3] Limited information indicates that a maternal continuous intravenous fluorouracil infusion at a dose of 200 mg/square meter daily produces undetectable levels in milk. If fluorouracil use is undertaken, monitoring of the infant's complete blood count and differential is advisable. Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[4] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.[5]

Topical fluorouracil applied away from the breast should pose negligible risk for the breastfed infant. If the mother requires topical fluorouracil, it is not a reason to discontinue breastfeeding. Do not apply fluorouracil to the breast or nipple and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated

### Drug Levels

Maternal Levels. A mother who was 9 months postpartum was diagnosed with rectal cancer and began treatment with pelvic radiotherapy and a continuous intravenous infusion of fluorouracil 200 mg/square meter daily. Her plasma fluorouracil concentration was constant at about 110 micromoles/L (14.3 mg/L) from weeks 2 to 5 of therapy. She discontinued nursing her infant and pumped her breasts twice daily and collected 36 breastmilk samples before, during and for 10 days following fluorouracil therapy (exact times not specified). Fluorouracil was undetectable (<0.5 micromole/L [<65 mcg/L]) in all of the milk samples.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman was diagnosed with colorectal cancer at 26 weeks of gestation. She was treated with unspecified doses of fluorouracil, oxaliplatin, and calcium folinate (leucovorin calcium) at 28 weeks in the first of 3 planned doses. However, the infant was born at 30 weeks gestation, 14 days after the first dose. On day 1 postpartum, the infant was given colostrum mouth care and the mother’s milk supply was initiated. On days 8 and 22 postpartum, the infusions of fluorouracil were given, without oxaliplatin. Pumped breastmilk was fed to the infant except for the 48 hours of fluorouracil infusion and for the 24 hours afterward. The infant was exclusively breastfed on discharged from the NICU on day 50 and at 11 months postpartum, the infant was thriving.[3]

### Effects on Lactation and Breastmilk

A telephone follow-up study was conducted on 74 women who received cancer chemotherapy at one center during the second or third trimester of pregnancy to determine if they were successful at breastfeeding postpartum. Only 34% of the women were able to exclusively breastfeed their infants, and 66% of the women reported experiencing breastfeeding difficulties. This was in comparison to a 91% breastfeeding success rate in 22 other mothers diagnosed during pregnancy, but not treated with chemotherapy. Other statistically significant correlations included: 1. mothers with breastfeeding difficulties had an average of 5.5 cycles of chemotherapy compared with 3.8 cycles among mothers who had no difficulties; and 2. mothers with breastfeeding difficulties received their first cycle of chemotherapy on average 3.4 weeks earlier in pregnancy. Of the 9 women who received a fluorouracil-containing regimen, 8 had breastfeeding difficulties.[5]

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207–11.23199900
2 Johnson HM, Mitchell KB. ABM clinical protocol #34: Breast cancer and breastfeeding. Breastfeed Med 2020;15:429–34.32516007
3 Wilson G, Calder A, Allermo Fletcher A. Exclusive breastfeeding of a premature infant following maternal administration of chemotherapy for bowel cancer: A case study. J Hum Lact 2026;42:387–95.41866778
4 Urbaniak C, McMillan A, Angelini M, et al. Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513
5 Stopenski S, Aslam A, Zhang X, et al. After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible? Breastfeed Med 2017;12:91–7.28170295
6 Peccatori FA, Giovannetti E, Pistilli B, et al. "The only thing I know is that I know nothing": 5-fluorouracil in human milk. Ann Oncol 2012;23:543–4.22275286

## Substance Identification

### Substance Name

Fluorouracil

### CAS Registry Number

51-21-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antimetabolites

Antineoplastic Agents

Antimetabolites, Antineoplastic

Immunosuppressive Agents